# Ublituximab

CASRN: 1174014-05-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ublituximab during breastfeeding. Because ublituximab is a large protein molecule with a molecular weight of 147,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[2] Ublituximab is considered to be acceptable to use during breastfeeding.[3] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, . A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
4 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808

## Substance Identification

### Substance Name

Ublituximab

### CAS Registry Number

1174014-05-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Antibodies, Monoclonal